# Carbon- 11

CASRN: 14333-33-6

## Drug Levels and Effects

### Summary of Use during Lactation

Information in this record refers to the use of carbon 11 radiopharmaceuticals as diagnostic agents. International guidelines recommend state that breastfeeding need not be interrupted after administration of radiopharmaceuticals containing carbon-11.[1,2]

### Drug Levels

Carbon 11 decays by positron emission and electron capture with a half-life of 20.4 minutes.[2]

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Mattsson S, Johansson L, Leide Svegborn S, et al. Radiation dose to patients from radiopharmaceuticals: A compendium of current information related to frequently used substances. ICRP Publication 128. Annex D. Recommendations on breast-feeding interruptions. Ann ICRP 2015;44:7-321.26069086
2 Dilsizian V, Metter D, Palestro C, Zanzonico P. Advisory Committee on Medical Uses of Isotopes (ACMUI) Sub-Committee on Nursing Mother Guidelines for the Medical Administration of Radioactive Material. Final report submitted: January 31, 2019. 2019. https://www.nrc.gov/docs/ML1903/ML19038A498.pdf

## Substance Identification

### Substance Name

Carbon- 11

### CAS Registry Number

14333-33-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Carbon Radioisotopes

Radiopharmaceuticals

Diagnostic Agents